# Demeclocycline

CASRN: 127-33-3

## Drug Levels and Effects

### Summary of Use during Lactation

A number of reviews have stated that tetracyclines are contraindicated during breastfeeding because of possible staining of infants’ dental enamel or bone deposition. However, available literature indicates that there is not likely to be harm in short-term use of demeclocycline during lactation because milk levels are low and absorption by the infant is inhibited by the calcium in breastmilk. Although the manufacturer recommends avoiding breastfeeding during administration of demeclocycline, short-term use of demeclocycline is probably acceptable in nursing mothers. As a theoretical precaution, avoid prolonged or repeat courses during nursing. Monitor the infant for rash and for possible effects on the gastrointestinal flora, such as diarrhea or candidiasis (thrush, diaper rash).

### Drug Levels

Maternal Levels. In 9 women, colostrum levels of demeclocycline ranged from 50 mcg/L to 1 mg/L during a dosage regimen of oral demeclocycline 600 mg daily for 1 to 5 days. Low levels of the drug were detectable in milk for up to 6 days after discontinuation of the drug.[1]

Thirty-six women were studied after receiving oral demeclocycline 300 mg daily for 1 to 9 days after delivery. Demeclocycline was undetectable in milk after a single dose of 300 mg. After repeated doses, milk levels ranged from undetectable to 1.4 mg/L at various times after the dose.[1]

Using the data above, it is estimated that a breastfed infant would receive a maximum of 200 to 300 mcg daily.[1,2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Doxycycline, Tetracycline

### References

1 von Kobyletzki D, Strauch D. Demethylchloreteracycline in the umbilical vein blood and the amniotic fluid. Z Geburtshilfe Gynakol 1962;159:246–51.14042216
2 von Kobyletzki D. Personal studies on pharmacokinetics during the peripartal and nursing period. Med Welt 1968;38:2010–9.5712895

## Substance Identification

### Substance Name

Demeclocycline

### CAS Registry Number

127-33-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Tetracyclines